# Black Pepper

CASRN: 84929-41-9; 94-62-2

## Drug Levels and Effects

### Summary of Use during Lactation

Black pepper (Piper nigrum) contains piperine, which is the main pungent component. Piperine is often incorporated into turmeric products because it enhances the oral bioavailability of curcumin. Piperine can be found in breastmilk after maternal ingestion, but the piperine levels appear to be far below the taste threshold after ingestion of typical dietary amounts of pepper.[1] No studies have been performed with ingestion of piperine-containing pharmaceutical products. Black pepper and the related long pepper (Piper longum) are reportedly used to increase milk supply in India;[2] however, no scientifically valid clinical trials support this use.

### Drug Levels

Maternal Levels. Thirteen nursing mothers who were nursing their infants were served a curry dish that contained an average piperine concentration of 264 nmol/gram (75 mcg/gram) of the curry sauce. The peak piperine concentration in milk of 31.2 nM (8.9 mcg/L) occurred at 1 hour after the meal in these mothers with a low basal piperine concentration in milk. The authors assumed that the concentration of piperine was too low for conscious detection by the nursing infant, but that it could contribute to a sensory desensitization toward pungency in later life.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 N'Diaye K, Debong M, Behr J, et al. Dietary piperine is transferred Into the milk of nursing mothers. Mol Nutr Food Res 2021;65:2100508.34633734
2 Goyal M. Use of ethnomedicinal plants for prophylaxis and management of postpartum complications among the Marwari community of Jodhpur District of Rajasthan. Food Qual Saf 2017;1:203-10. doi:10.1093/fqsafe/fyx013

## Substance Identification

### Substance Name

Black Pepper

### Scientific Name

Piper nigrum

### CAS Registry Number

84929-41-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cytochrome P-450 Enzyme Inhibitors